# Relugolix

CASRN: 737789-87-6

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of relugolix during breastfeeding. However, amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants. If a mother requires relugolix, it is not a reason to discontinue breastfeeding, but until more data are available, it should only be used with careful infant monitoring during breastfeeding.

### Drug Levels

Maternal Levels. Eight healthy lactating women who were at least 4 weeks postpartum took a single 40 mg dose of relugolix. Milk samples were obtained before the dose and at 11 intervals over the following 120 hours. The peak milk concentration averaged 15.7 mcg/L and occurred at 5.8 (range 2.8 to 8.8) hours. A total dose of 0.0051 mg (1.3% of the maternal dose) was excreted over the first 24 hours after the dose. The authors calculated a relative infant dose of 0.25% after the single dose. Relugolix has a long half-life, and its steady-state plasma concentration would be double that of a single dose. Therefore, with repeated dosing the RID would be approximately 0.5% at steady-state.[1,2]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Brimhall DB, Chen YL, Lee S, et al. Transfer of the oral gonadotropin-releasing hormone receptor antagonist relugolix into breast milk of healthy lactating women. Pharmacol Res Perspect 2025;13:e70067.39887952
2 Praween N, Khan W. Transfer of the oral gonadotropin-releasing hormone receptor antagonist relugolix into breast milk of healthy lactating women. Int J Life Sci Biotechnol Pharma Res 2025;14:1080-7. doi:10.69605/ijlbpr_14.2.2025.194

## Substance Identification

### Substance Name

Relugolix

### CAS Registry Number

737789-87-6

### Drug Class

Breast Feeding

Lactation

Milk, Human

Androgen Antagonists